# Mineral Oil

CASRN: 8012-95-1; 8020-83-5

## Drug Levels and Effects

### Summary of Use during Lactation

Small amounts of mineral oil can be found in breastmilk, apparently from absorption of hydrocarbons from cosmetics over long periods of time. Because mineral oil is poorly absorbed orally, little or none will not reach the bloodstream of the infant or cause any adverse effects in breastfed infants.[1] One small study supports the lack of effect of maternal mineral oil on the bowels of their breastfed infants. Oral use of mineral oil by the nursing mother is acceptable, although repeated use should be avoided because it may cause a deficiency of fat-soluble vitamins. The use of mineral oil or ointments containing mineral oil on or near the breast may expose the infant to high levels of mineral paraffins via licking.[2] Only water-miscible cream products should be applied to the breast.

### Drug Levels

Maternal Levels. In a study of women undergoing cesarean section, subcutaneous fat was removed to analyze it for mineral oil saturated hydrocarbons. Hindmilk was collected from some of the women on days 4 (n = 107) and 20 (n = 71) and also analyzed for these substances. The mean hydrocarbon content of milk fat on day 4 was 55 mg/kg of fat and on day 20 it was 15 mg/kg of fat. The amount in milk fat was correlated with the amount in subcutaneous fat. Based on questionnaires completed by the women, it appeared that the source of the hydrocarbons was accumulation over time from the application of cosmetics, such as sunscreen, hand cream and lipstick.[3,4]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Fifty mothers who were in the first day postpartum received 15 mL of either mineral oil or Magnolax (equivalent to 3.75 mL of mineral oil and 900 mg of magnesium hydroxide), although the exact number who received each product was not stated. Additional doses were given on subsequent days if needed. None of their breastfed infants were noted to have any markedly abnormal stools, although all of the infants also received supplemental feedings.[5]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Laxative) Bisacodyl, Magnesium Hydroxide, Senna

### References

1 Hagemann TM. (1998). Gastrointestinal medications and breastfeeding. J Hum Lact.
2 Noti A, Grob K, Biedermann M, et al. (2003). Exposure of babies to C(15)-C(45) mineral paraffins from human milk and breast salves. Regul Toxicol Pharmacol.
3 Concin N, Hofstetter G, Plattner B, et al. (2008). Mineral oil paraffins in human body fat and milk. Food Chem Toxicol.
4 Concin N, Hofstetter G, Plattner B, et al. (2011). Evidence for cosmetics as a source of mineral oil contamination in women. J Womens Health (Larchmt).
5 Baldwin WF. (1963). Clinical study of senna administration to nursing mothers: Assessment of effects on infant bowel habits. Can Med Assoc J.

## Substance Identification

### Substance Name

Mineral Oil

### CAS Registry Number

8012-95-1; 8020-83-5

### Drug Class

Breast Feeding

Lactation

Emollients

Gastrointestinal Agents

Laxatives